# Bisacodyl

CASRN: 603-50-9

## Drug Levels and Effects

### Summary of Use during Lactation

Bisacodyl is not absorbed from the gastrointestinal tract, and its active metabolite, which is absorbed, is not detectable in breastmilk. Bisacodyl can be taken during breastfeeding and no special precautions are required.

### Drug Levels

Maternal Levels. Sixteen postpartum women who were not breastfeeding, but were producing at least 200 mL of milk daily by breast pump were given either oral enteric-coated bisacodyl tablets (Dulcolax) 10 mg daily or oral liquid sodium picosulfate (Laxoberal) 10 mg daily for 7 days. Both drugs are prodrugs metabolized to the active drug, bis-(p-hydroxyphenyl)-2-pyridyl-2-methane (BHPM). All breastmilk was collected daily from the day before drug administration to 2 days after the last dose. Free and conjugated BHPM were undetectable (<1 mcg/L) in all milk samples.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Docusate, Magnesium Hydroxide, Psyllium, Senna

### References

1 Friedrich C, Richter E, Trommeshauser D, et al. (2011). Lack of excretion of the active moiety of bisacodyl and sodium picosulfate into human breast milk: an open-label, parallel group, multiple dose study in healthy lactating women. Drug Metab Pharmacokinet.

## Substance Identification

### Substance Name

Bisacodyl

### CAS Registry Number

603-50-9

### Drug Class

Breast Feeding

Lactation

Cathartics

Gastrointestinal Agents